# Perflutren

CASRN: 76-19-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of perflutren during breastfeeding. Because of the extremely short elimination half-life of perflutren (<2 minutes) from the body, use of perflutren either as albumin microspheres or lipid microspheres is acceptable in nursing mothers.[1] Because of the lack of information, the American College of Radiology states that temporary (~24 hours) pumping and discarding of milk may be considered.[2,3] However, this recommendation appears to be excessively cautious.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Cova MA, Stacul F, Quaranta R, et al. Radiological contrast media in the breastfeeding woman: A position paper of the Italian Society of Radiology (SIRM), the Italian Society of Paediatrics (SIP), the Italian Society of Neonatology (SIN) and the Task Force on Breastfeeding, Ministry of Health, Italy. Eur Radiol 2014;24:2012-22 24838733
2 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2023;Version 2023:120-1. https://www.acr.org/Clinical-Resources/Contrast-Manual
3 Bookwalter CA, McDonald RJ, Packard AT, et al. Contrast media in pregnant and lactating patients, from the AJR special series on contrast media. AJR Am J Roentgenol 2024;224:e2431415 39046138

## Substance Identification

### Substance Name

Perflutren

### CAS Registry Number

76-19-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents

Fluorocarbons

Gases